# Mepivacaine

CASRN: 96-88-8

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the use of mepivacaine during breastfeeding. Based on the low excretion of other local anesthetics into breastmilk, a single dose of mepivacaine during breastfeeding is unlikely to adversely affect the breastfed infant. However, an alternate drug may be preferred, especially while nursing a newborn or preterm infant.

Mepivacaine given during labor as a local anesthetic to the mother has been reported to interfere with initial nursing behavior of some infants, but not weight gain during the first 5 days postpartum. Although not well studied specifically with mepivacaine, it appears that with good breastfeeding support, epidural local anesthetics with or without fentanyl or one of its derivatives has little or no adverse effect on breastfeeding success.[1] Labor pain medication may delay the onset of lactation. More study is required to clarify the effect of mepivacaine during labor on breastfeeding outcome.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

In a study that compared extradural administration of mepivacaine, bupivacaine and lidocaine for analgesia during normal childbirth, no differences were found in weight changes over the first 5 days after delivery among the breastfed infants of the 3 groups. Overall weight gain was within normal limits for all groups.[2]

Of 6 infants whose mothers received a pudendal block with mepivacaine within the hour before delivery, 4 took longer to begin nursing behavior and nursed less initially than 10 infants whose mothers received no anesthesia during labor. The long-term consequences of these differences were not reported.[3]

A national survey of women and their infants from late pregnancy through 12 months postpartum compared the time of lactogenesis II in mothers who did and did not receive pain medication during labor. Categories of medication were spinal or epidural only, spinal or epidural plus another medication, and other pain medication only. Women who received medications from any of the categories had about twice the risk of having delayed lactogenesis II (>72 hours) compared to women who received no labor pain medication.[4]

### References

1 Heesen P, Halpern SH, Beilin Y, et al. (2020). Labor neuraxial analgesia and breastfeeding: An updated systematic review. J Clin Anesth.
2 Abouleish E, Donck AV, Meeuwis H, et al. (1978). Effect of anaesthesia for delivery on the weight of infants during the first 5 days of life. Br J Anaesth.
3 Ransjö-Arvidson AB, Matthiesen AS, Lilja G, et al. (2001). Maternal analgesia during labor disturbs newborn behavior: Effects on breastfeeding, temperature, and crying. Birth.
4 Lind JN, Perrine CG, Li R. (2014). Relationship between use of labor pain medications and delayed onset of lactation. J Hum Lact.

## Substance Identification

### Substance Name

Mepivacaine

### CAS Registry Number

96-88-8

### Drug Class

Breast Feeding

Lactation

Anesthetics, Local